# Brensocatib

CASRN: 1802148-05-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of brensocatib during breastfeeding. Because brensocatib is about 87% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires brensocatib, it is not a reason to discontinue breastfeeding. Until more data become available, brensocatib should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Brensocatib

### CAS Registry Number

1802148-05-5

### Drug Class

Breast Feeding

Lactation

Milk, Human